# Aminolevulinic Acid

CASRN: 106-60-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of oral aminolevulinic acid during breastfeeding. To minimize exposure of the infant, breastfeeding can be withheld for 24 hours after an oral dose. Breastfeeding is not expected to result in exposure of the child to topical aminolevulinic acid due to negligible systemic absorption. Aminolevulinic acid-induced photodynamic therapy has been used successfully to treat various skin lesions of the nipple. This treatment appeared to preserve nipple anatomy for breastfeeding.[1-3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Zhou X, Zheng M, Zou Y, et al. (2021). 5-Aminolevulinic acid induced photodynamic therapy (ALA-PDT) for erosive adenomatosis of the nipple: A case report. Photodiagnosis Photodyn Ther.
2 Xu S, Wang X, Xu W, et al. (2002). Evaluation of photodynamic therapy of skin cancers with partial differential alpha-aminolevulinic acid. Chin Med J (Engl).
3 Ye E, Wang W, Wu Y, et al. Cryotherapy combined with photodynamic therapy for successful treatment of condyloma acuminatum in special sites such as the nipple and the nasal vestibule: A series of two case reports. Photodiagnosis Photodyn Ther 2022:102930.

## Substance Identification

### Substance Name

Aminolevulinic Acid

### CAS Registry Number

106-60-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Photosensitizing Agents